# Anthralin

CASRN: 1143-38-0

## Drug Levels and Effects

### Summary of Use during Lactation

Topical anthralin has not been studied during breastfeeding. Anthralin has suspected mutagenic properties, so it should only be used if the potential benefit to the mother justifies potential risk to the infant.[1] If anthralin is used, ensure that the infant's skin does not come into direct contact with the areas of maternal skin that have been treated and the infant does not ingest the product from the mother's skin.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gottlieb AB, Ryan C, Murase JE. (2019). Clinical considerations for the management of psoriasis in women. Int J Womens Dermatol.

## Substance Identification

### Substance Name

Anthralin

### CAS Registry Number

1143-38-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents